# Methicillin

CASRN: 61-32-5

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of methicillin ingested by the infant in breastmilk are small and would not be expected to cause any adverse effects. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Methicillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Intramuscular injections of methicillin 1 gram every 6 hours for 6 to 9 days in 17 women with monolateral mastitis yielded methicillin levels in milk that reached a peak of 0.31 mg/L at 3 hours after the first dose on the first day in the healthy breast, and much lower levels in the breast with mastitis. After the last dose, peak milk levels of 1.53 mg/L occurred 6 hours after the dose. Methicillin milk levels from both breasts were equal.[1]

After a single intramuscular dose of 1 gram of methicillin in 3 women, milk levels ranged from 0.2 to 0.3 mg/L between 1 and 6 hours.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Dicloxacillin, Floxacillin, Oxacillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Kulakov VI, Zak IR, Kulikova NN, et al. Body pharmacokinetics of methicillin, oxacillin and cephaloridine in puerperal mastitis. Antibiotiki 1981;26:110-3.7212690
2 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Methicillin

### CAS Registry Number

61-32-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins